# Atractylodes macrocephala

Permissions
Copyright Statement | License text | License type | License URL

## Drug Levels and Effects

### Summary of Use during Lactation

Atractylodes macrocephala root is a traditional Chinese herbal medicine that has anti-inflammatory, antioxidant, antiemetic, and immunomodulatory activities.[1] It has been used in various herbal galactogogue mixtures.[2,3] It has also been used as part of an herbal mixture for treating mastitis and breast abscess.[4-6] Because it is used in mixtures, its contribution to any outcome cannot be assessed. Its safety in breastfeeding is unknown.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A study in Japan compared the use of a mixture of 13 herbs, including dong quai, to ergonovine for their effects on lactation and serum prolactin in postpartum women. The herbal mixture, called Xiong-gui-tiao-xue-yin, was given in a randomized fashion to 41 women in a dose of 2 grams of a dried aqueous extract 3 times daily. A comparable group of 41 women were randomized to receive methylergonovine 0.375 mg daily. Therapy was started on the day of delivery, but the duration of therapy was not specified. Plasma (https://www.ncbi.nlm.nih.gov/books/n/lactmed/drugandlactglossary/def-item/plasma/) oxytocin and prolactin were measured on days 1 and 6; milk volumes were measured daily, although the method of measuring milk volume was not specified. Serum (https://www.ncbi.nlm.nih.gov/books/n/lactmed/drugandlactglossary/def-item/serum/) prolactin was higher on days 1 and 6 in the women who received the herbals; plasma oxytocin was lower on day 1 in the women who received the herbal, but not different on day 6. Milk volumes were greater on days 4, 5, and 6 in women who received the herbal mixture.[6 (https://www.ncbi.nlm.nih.gov/books/NBK501836/)] This study has serious flaws that make its interpretation impossible. First, milk volume measurement is subject to considerable variability depending on the measurement method used, but the method was not specified. Second, methylergonovine has caused decreases in serum prolactin and milk production in some studies.[7 (https://www.ncbi.nlm.nih.gov/books/NBK501836/),8 (https://www.ncbi.nlm.nih.gov/books/NBK501836/)] Because of the lack of a placebo group, the differences found could be a negative effect of methylergonovine rather than a positive effect of the herbal preparation. Because this study used a multi-ingredient combination product in which dong quai was only one component, the results might be different from studies in which dong quai was used alone.

A randomized controlled study evaluated the efficacy of an herbal galactagogic decoction combined with auricular acupressure in improving lactation outcomes. The decoction was self-formulated consisting of Wang Bu Liu Xing (Vaccaria seeds) 10 grams, Glycyrrhiza glabra (licorice) 6 grams, Astragalus membranaceus 12 grams, Angelica sinensis (dong quai) 12 grams, Atractylodes macrocephala 10 grams, Tongzhi 30 grams, Codonopsis pilosula (dangshen) 12 grams, and Andrographis paniculata (green chiretta) 6 grams. One daily dose was decocted in water to yield approximately 200 mL of liquid, which was divided into 2 oral doses per day. Both groups were treated for 2 weeks. A total of 104 women with postpartum hypogalactia were randomly assigned to a control group (auricular acupressure alone, n = 52) or an intervention group (auricular acupressure plus herbal decoction, n = 52) for 2 weeks. Primary outcomes included milk production and formula supplementation, while secondary outcomes were serum hormone levels (estradiol, progesterone, and prolactin), symptom scores, psychological status, and clinical effectiveness. Compared with the control group, the intervention group demonstrated lower estradiol and progesterone levels, higher prolactin levels, increased milk production, and reduced formula supplementation.[7]

### References

1 Singh K., Singh G., Bhushan B., et al. A comprehensive pharmacological review of Atractylodes macrocephala: Traditional uses, phytochemistry, pharmacokinetics, and therapeutic potential. Pharmacological Research Modern Chinese Medicine 2024;10:100394. doi:10.1016/j.prmcm.2024.100394
2 Ushiroyama T, Sakuma K, Souen H, et al. Xiong-gui-tiao-xue-yin (Kyuki-chouketsu-in), a traditional herbal medicine, stimulates lactation with increase in secretion of prolactin but not oxytocin in the postpartum period. Am J Chin Med 2007;35:195–202.17436360
3 Chao J, Ko CY, Lin CY, et al. Ethnobotanical survey of natural galactagogues prescribed in traditional Chinese medicine pharmacies in Taiwan. Front Pharmacol 2021;11:625869.33679390
4 Jin LH, Zheng HL, Lin YX, et al. Lactation breast abscess treated with Gualou Xiaoyong decoction and painless lactation manipulation: A case report and review of literature. World J Clin Cases 2023;11:1847–56.36970011
5 Ye H, Hu D, Zheng H, et al. Clinical efficacy of Gualou Xiaoyong decoction and painless lactation manipulation in treating lactation acute mastitis and breast abscess: An observational study. Medicine (Baltimore) 2023;102:e34617.37653765
6 Xia J, Zhou Z, Wu Z, et al. The initial efficacy of comprehensive treatment of external treatment of traditional Chinese medicine on acute mastitis during lactation and its influence on patients' symptoms. Altern Ther Health Med 2024;30:31–7.37917897
7 Li K, Cai D, Gao Z, et al. Effect of a herbal galactagogic formula combined with auricular acupressure on breast milk production and hormonal profiles in women with postpartum hypogalactia: A randomized controlled study. Afr J Reprod Health 2026;30:46–54.42138144

## Substance Identification

### Substance Name

Atractylodes macrocephala

### Scientific Name

Atractylodes macrocephala

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal